# Nalfurafine

CASRN: 152657-84-6

## Drug Levels and Effects

### Summary of Use during Lactation

Nalfurafine is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in other countries. No information is available on the clinical use of nalfurafine during breastfeeding. Until more data become available, nalfurafine should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Nalfurafine

### CAS Registry Number

152657-84-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipruritics